# Acebutolol

CASRN: 37517-30-9

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the relatively extensive excretion of acebutolol and its active metabolite diacetolol into breastmilk and some possible reports of adverse reactions in breastfed infants, other agents are preferred, especially while nursing a newborn or preterm infant.[1-3]

### Drug Levels

The excretion of beta-adrenergic blocking drugs into breastmilk is largely determined by their protein binding. Those with low binding such as acebutolol (25%) are more extensively excreted into breastmilk.[4] Diacetolol is a renally excreted metabolite with equal beta-blocking activity that is more extensively excreted into breastmilk than acebutolol. In newborn infants, the apparent half-lives of acebutolol and diacetolol averaged 10.1 to 15.6 hours and 19.8 hours, respectively.[5,6] It is estimated that a fully breastfed infant would receive about 3.5% of the maternal weight-adjusted dosage of acebutolol.[7]

Maternal Levels. One mother with renal impairment taking 400 mg daily of acebutolol 3 days postpartum had milk levels of 1.5 mg/L of acebutolol and 2.6 mg/L of diacetolol at an unspecified time after the dose. Another mother with renal impairment taking 1200 mg daily of acebutolol 3 days postpartum had milk levels of 1.1 mg/L before a 400 mg dose and 4.1 mg/L 1.5 hours after the dose. Diacetolol milk levels were 6.3 and 6.6 mg/L, respectively, at the same times. A third mother with no renal impairment had milk acebutolol levels ranging from 0.5 to 0.7 mg/L and diacetolol levels of 1.2 to 1.8 mg/L at unspecified times while taking 200 to 600 mg daily of acebutolol from 6 to 9 days postpartum.[1]

A mother with pre-eclampsia took 100 mg of acebutolol daily in the morning at 8 am. On the day after delivery, a milk sample at 4 pm contained 41 and 48 mcg/L of R- and S-acebutolol, respectively, and 141 and 88 mcg/L of R- and S-diacetolol, respectively. On the next day, a milk sample at 12:30 pm contained 127 and 148 mcg/L of R- and S-acebutolol, respectively, and 112 and 57 mcg/L of R- and S-diacetolol, respectively.[8]

Infant Levels. One mother with renal impairment was taking 400 mg daily of acebutolol and had high plasma levels of acebutolol and its active metabolite diacetolol. Her infant had serum levels of acebutolol and diacetolol of 244 mcg/L and 594 mcg/L, respectively, on day 1 of life which decreased to 40 and 221 mcg/L on day 4 of life when breastfeeding was begun. On day 5, 24 hours after beginning breastfeeding, serum levels of acebutolol and diacetolol increased to 85 mcg/L and 803 mcg/L, respectively. On day 7 of life, acebutolol and diacetolol were 28 mcg/L and 90 mcg/L, respectively. On day 8 levels were 72 mcg/L and 261 mcg/L, respectively. The infants of two other nursing mothers taking 200 mg daily and 400 mg daily, infant plasma levels dropped rapidly after birth.[1]

### Effects in Breastfed Infants

A study of mothers taking beta-blockers during nursing found a numerically, but not statistically significant increased number of adverse reactions in those taking any beta-blocker. Although the ages of infants were matched to control infants, the ages of the affected infants were not stated. One mother reported no adverse effects in her breastfed infant (age unstated) during acebutolol use.[9]

Hypotension, bradycardia, and transient tachypnea occurred in a newborn infant, probably because of acebutolol and diacetolol in breastmilk. The mother was taking 400 mg daily of acebutolol and had renal impairment. Two other neonates in this report who were breastfed had no adverse reactions noted.[1]

A mother with essential hypertension had been taking acebutolol for several years. She continued the drug during her first pregnancy and while breastfeeding. Her infant was generally healthy, but seemed to have decreased muscle tone. She stopped the drug, but the infant continued to have stridor and possible sleep apnea. She was also taking acebutolol during her second pregnancy, but her blood pressure was uncontrolled and a cesarean section was performed. The infant did well in the NICU, except for decreased tone including lying with extremities extended, an incomplete Moro response and marked head lag. The infant was not breastfed. It is possible that the late postpartum adverse effects in the first infant were caused by acebutolol and diacetolol in breastmilk, but no measurements of infant plasma drug levels were made.[8]

### Effects on Lactation and Breastmilk

Relevant published information on the effects of beta-blockade or acebutolol during normal lactation was not found as of the revision date. A study in 6 patients with hyperprolactinemia and galactorrhea found no changes in serum prolactin levels following beta-adrenergic blockade with propranolol.[10]

### Alternate Drugs to Consider

Propranolol, Labetalol, Metoprolol

### References

1 Boutroy MJ, Bianchetti G, Dubruc C, et al. To nurse when receiving acebutolol: Is it dangerous for the neonate? Eur J Clin Pharmacol 1986;30:737-9.3770068
2 Chow T, Galvin J, McGovern B. Antiarrhythmic drug therapy in pregnancy and lactation. Am J Cardiol 1998;82:58I-62I.9737655
3 Hale TW. Medications in breastfeeding mothers of preterm infants. Pediatr Ann 2003;32:337-47.12774709
4 Riant P, Urien S, Albengres E, et al. High plasma protein binding as a parameter in the selection of betablockers for lactating women. Biochem Pharmacol 1986;35:4579-81.2878668
5 Bianchetti G, Boutroy MJ, Dubruc C, et al. Placental transfer and pharmacokinetics of acebutolol and N-acetyl acebutolol in the newborn. Br J Pharmacol 1981;72:135p-6p. doi:10.1111/j.1476-5381.1981.tb09112.x
6 Bianchetti G, Dubruc C, Vert P, et al. Placental transfer and pharmacokinetics of acebutolol in newborn infants. Clin Pharmacol Ther 1981;29:233-4. doi:10.1038/clpt.1981.37
7 Atkinson HC, Begg EJ, Darlow BA. Drugs in human milk: Clinical pharmacokinetic considerations. Clin Pharmacokinet 1988;14:217-40.3292101
8 Abolfazl Mostafavi S, Stinson DA, Dooly K, et al. Excretion of acebutolol and its major metabolite diacetolol into infant blood circulation and the breast milk. Iran J Pharm Res 2003;2:141-4. doi:10.22037/IJPR.2010.47
9 Ho TK, Moretti ME, Schaeffer JK, et al. Maternal beta-blocker usage and breast feeding in the neonate. Pediatr Res 1999;45 (4, pt. 2):67A. doi:10.1203/00006450-199904020-00402
10 Board JA, Fierro RJ, Wasserman AJ, et al. Effects of alpha- and beta-adrenergic blocking agents on serum prolactin levels in women with hyperprolactinemia and galactorrhea. Am J Obstet Gynecol 1977;127:285-7.556882

## Substance Identification

### Substance Name

Acebutolol

### CAS Registry Number

37517-30-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Adrenergic Beta-Antagonists

Antiarrhythmics